# Tadalafil

CASRN: 171596-29-5

## Drug Levels and Effects

### Summary of Use during Lactation

No published information is available on the use of tadalafil during breastfeeding or on macitentan, which is in the combination product Opsumit. An alternate agent may be preferred. The manufacturer recommends that breastfeeding be discontinued during Opsumit therapy. Tadalafil should be completely eliminated from milk in 4 days. Macitentan and its active metabolite should be completely eliminated from milk in 10 days.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Pulmonary Artery Hypertension) Bosentan, Epoprostenol, Nitric Oxide, Sildenafil, Treprostinil

## Substance Identification

### Substance Name

Tadalafil

### CAS Registry Number

171596-29-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Phosphodiesterase 5 Inhibitors

Urologic Agents

Vasodilator Agents